# Carboplatin

CASRN: 41575-94-4

## Drug Levels and Effects

### Summary of Use during Lactation

After carboplatin administration to nursing mothers, excretion of platinum into milk occurs. The exact forms and toxicities of platinum excreted into breastmilk are not known. The nursing infant would receive platinum compounds orally rather than intravenously and oral absorption of platinum compounds by infants is not known. Platinum in milk may increase with repeated courses of chemotherapy. Most sources consider that mothers receiving antineoplastic therapy should not breastfeed, especially with alkylating agents such as cisplatin.[1] It is probably not safe to breastfeed during carboplatin therapy, and breastfeeding should be discontinued. Resuming breastfeeding 3 weeks after the last dose of cisplatin has been done safely in one case.[2]

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[3] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[4]

### Drug Levels

Maternal Levels. A woman with a history of treatment for thyroid cancer and recurrence during pregnancy was treated postpartum with carboplatin and paclitaxel. Her intravenous carboplatin dose was 233 mg (2.9 mg/kg; AUC 1.5) weekly for 6 weeks. Whole milk samples were obtained at 4, 28, 172, and 316 hours after the dose. The highest milk carboplatin level was 0.9 mg/L in the 4-hour sample and carboplatin was still measurable (0.16 mg/L) in the 317 hour sample. Metabolites were not measured. The authors calculated an average milk carboplatin level over the 316 hour collection period of 0.4 mg/L, resulting in an estimated total infant weight-adjusted daily dose of 2% of the maternal weekly dose.[5] Note that the above estimate of an infant daily dose is expressed as percentage of the maternal weekly dose, and that the authors used a level of zero as the trough milk level, rather than a milk level taken before the sixth dose (which would equal approximately the 172-hour level of 0.25 mg/L), resulting in an underestimate of the AUC and infant dose.

A woman with breast cancer diagnosed during pregnancy received chemotherapy beginning a few days after delivery. It consisted of doxorubicin 118 mg and cyclophosphamide 1180 mg every 2 weeks for 4 cycles, followed by paclitaxel 156 mg weekly and carboplatin 900 mg every 4 weeks. She collected 97 milk samples; a selection of 78 samples were analyzed for carboplatin. Reported carboplatin concentrations in the milk samples were calculated based on the measured platinum concentrations using the molecular weight of carboplatin with the assumption that all measured platinum was carboplatin. Peak levels ranged from 160 mcg/L to 350 mcg/L. Milk levels dropped rapidly to less than 100 mcg/L by 2 days after the dose. Platinum levels plateaued after several days at levels between 10 and 50 mcg/L that appeared to increase with repeated cycles of chemotherapy. The authors calculated the times for the milk concentrations to reach various relative infant dosage (RID) levels. It took less than 1 day to fall below an RID of 1%; however, the actual platinum species in milk were not determined.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy, but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 cycles of chemotherapy compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 3 women who received a regimen containing the similar drug, cisplatin, 1 had breastfeeding difficulties.[4]

### References

1 Pistilli B, Bellettini G, Giovannetti E, . Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Tanaka YK, Yamazaki K, Yomogita N, . Evaluation of platinum transfer to breast milk in cervical cancer patient undergoing cisplatin-based chemotherapy. Biol Trace Elem Res 2026;204:6317-25.42034865
3 Urbaniak C, McMillan A, Angelini M, . Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
4 Stopenski S, Aslam A, Zhang X, . After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91-7.28170295
5 Griffin SJ, Milla M, Baker TE, . Transfer of carboplatin and paclitaxel into breast milk. J Hum Lact 2012;28:457-9.23087196
6 Damoiseaux D, Calpe S, Rosing H, . Presence of 5 chemotherapeutic drugs in breast milk as a guide for the safe use of chemotherapy during breastfeeding: Results from a case series. Clin Pharmacol Ther 2022;112:404-10.35486426

## Substance Identification

### Substance Name

Carboplatin

### CAS Registry Number

41575-94-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Platinum Compounds